# Crotalidae Polyvalent Immune Fab

## Drug Levels and Effects

### Summary of Use during Lactation

Crotalidae polyvalent immune Fab is used to treat crotalid envenomation (rattlesnakes, copperheads, cottonmouths, water moccasins). No information is available on the clinical use of crotalidae polyvalent immune Fab during breastfeeding. Because it is a large protein molecule, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson P. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488

## Substance Identification

### Substance Name

Crotalidae Polyvalent Immune Fab

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies

Antidotes

Antivenins